# Lebrikizumab

CASRN: 953400-68-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of lebrikizumab during breastfeeding. Because lebrikizumab is a large protein molecule with a molecular weight of 145,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. If a nursing mother requires lebrikizumab, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

### Lebrikizumab

### CAS Registry Number

### 953400-68-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal